# Ethinyl Estradiol

CASRN: 57-63-6

## Drug Levels and Effects

### Summary of Use during Lactation

This record contains information specific to ethinyl estradiol used alone. Users with an interest in an oral contraceptive should consult the record entitled, record entitled, Contraceptives, Oral, Combined.

There is little information available on the use of ethinyl estradiol alone during breastfeeding. The concentration in milk is negligible with oral doses of 35 mcg or less daily. Based on studies on oral contraceptives that contain ethinyl estradiol, immediate side effects such as breast enlargement appear to occur rarely. It seems likely that doses of 30 mcg daily or greater can suppress lactation. The magnitude of the effect on lactation likely depends on the dose and the time of introduction postpartum. It is most likely to occur if the estrogen is started before the milk supply is well established at about 6 weeks postpartum. The decrease can happen over the first few days of estrogen exposure.[1] One small study suggests that vaginal rings containing ethinyl estradiol 15 mcg daily are associated with a modest decrease in

milk volume.

### Drug Levels

Maternal Levels. Four women who were fully nursing their infants were given a contraceptive containing ethinyl estradiol 50 mcg and megestrol acetate 4 mg beginning at 2 months postpartum. Another 4 women who were 6 to 18 months postpartum were given a single dose of 500 mcg of ethinyl estradiol. After 10 days of therapy, ethinyl estradiol was undetectable (<50 ng/L) in the milk of women who received the 50 mcg dose at several times after the dose. In those who receive 500 mcg, peak milk levels usually were found in the 3-hour sample although the peak was found in the 7-hour sample in one. Peak milk levels ranged from about 170 to 300 ng/L; levels dropped rapidly and were usually undetectable by 23 hours after the dose. Based on the higher dose, the authors estimated that a fully breastfed infant whose mother was taking 50 mcg of ethinyl estradiol daily would receive a dose of about 10 ng daily.[1]

Milk was collected and pooled from 2 groups of women who were taking ethinyl estradiol 100 mcg 3 times daily either immediately postpartum or after 1 to 6 months postpartum. Milk samples were collected 2 hours after the dose. Pooled milk was bioassayed for estrogenic activity and compared with the milk from lactating mothers taking no exogenous estrogens whose milk was collected at various times postpartum. No estrogenic activity was detected (<10 ng/80 mL of pooled milk [<0.125 mcg/L]) from women taking ethinyl estradiol above background estrogenic activity found in control colostrum.[2]

A study measured ethinyl estradiol in the milk of 14 breastfeeding women: 6 using combined oral contraceptives (15, 20, or 30 mcg daily of ethinyl estradiol), 7 using a vaginal ring (15 mcg daily of ethinyl estradiol), and 1 using a transdermal patch (35 mcg daily of ethinyl estradiol). A control group of 8 breastfeeding women not using hormonal contraceptives was also included. Ethinyl estradiol was undetectable (<3.5 mcg/L) in all of the women.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Published information was not found as of the revision date on the effects of ethinyl estradiol alone on breastfed infants. However, case reports exist of breast enlargement in the infants of mothers taking combination oral contraceptives that contained ethinyl estradiol or its prodrug, mestranol.[1,4,5]

### Effects on Lactation and Breastmilk

Published information was not found as of the revision date on the effects of ethinyl estradiol alone on milk production. However, numerous studies on combination contraceptives containing ethinyl estradiol or its prodrug mestranol indicate that doses of 30 mcg daily or greater might interfere with lactation.[6-11] One study that used a contraceptive containing 10 mcg of ethinyl estradiol found no effect on lactation.[12]

A retrospective cohort study compared 371 women who received high-dose estrogen (either 3 mg of diethylstilbestrol or 150 mcg of ethinyl estradiol daily)during adolescence for adult height reduction to 409 women who did not receive estrogen. No difference in breastfeeding duration was found between the two groups, indicating that high-dose estrogen during adolescence has no effect on later breastfeeding.[13]

In a small study on breastfeeding women who were 6 weeks to 6 months postpartum, participants completed a questionnaire on their breastfeeding. Women who were receiving contraception with a vaginal ring containing ethinyl estradiol 15 mcg and etonogestrel 120 mcg daily (NuvaRing) were compared to women who were receiving an oral contraceptive containing either ethinyl estradiol 20 mcg plus desogestrel 150 mcg daily, desogestrel 75 mcg daily alone, and breastfeeding women taking no hormonal contraception. The vaginal ring was associated with up to 20% reduced milk volume when comparing two timepoints before and after combines hormonal contraception introduction. The vaginal rings, but not oral contraceptives, were correlated with impairment in 5 of 12 breastfeeding variables: breastfeeding interval, self-expressed milk volume, use of milk substitutes, number of night-feedings, and number of full diapers.[14]

### Alternate Drugs to Consider

Estradiol

### References

1 Nilsson S, Nygren KG, Johansson ED. Ethinyl estradiol in human milk and plasma after oral administration. Contraception 1978;17:131–9.630883
2 Betrabet SS, Shikary ZK, Toddywalla VS, et al. ICMR Task Force Study on hormonal contraception. Biological activity of ethinyl estradiol present in the breast milk. Contraception 1986;34:169–75.3780231
3 Segev L, Ben Zimra A, Weitzman GA, et al. Ethinylestradiol transfer into breast milk of women using low-dose combined hormonal contraception is negligible. Open Access J Contracept 2025;16:189–97.41399541
4 Madhavapeddi R, Ramachandran P. Side effects of oral contraceptive use in lactating women - enlargement of breast in a breast-fed child. Contraception 1985;32:437–43.4085247
5 Marriq P, Oddo G. Gynecomastia in the newborn induced by maternal milk? An unusual complication of oral contraceptives. Nouv Presse Med 1974;3:2579.4467130
6 Kaern T. Effect of an oral contraceptive immediately post partum on initiation of lactation. Br Med J 1967;3:644–5.6038336
7 Guiloff E, Ibarra-Polo A, Zanartu J, et al. Effect of contraception on lactation. Am J Obstet Gynecol 1974;118:42–5.4128673
8 Peralta O, Díaz S, Juez G, et al. Fertility regulation in nursing women: V. Long-term influence of a low-dose combined oral contraceptive initiated at day 90 postpartum on lactation and infant growth. Contraception 1983;27:27–38.6404597
9 Croxatto HB, Díaz S, Peralta O, et al. Fertility regulation in nursing women: IV. Long-term influence of a low-dose combined oral contraceptive initiated at day 30 postpartum upon lactation and infant growth. Contraception 1983;27:13–25.6404596
10 Díaz S, Peralta O, Juez G, et al. Fertility regulation in nursing women: III. Short-term influence of a low-dose combined oral contraceptive upon lactation and infant growth. Contraception 1983;27:1–11.6404595
11 Nilsson S, Mellbin T, Hofvander Y, et al. Long-term follow-up of children breast-fed by mothers using oral contraceptives. Contraception 1986;34:443–57.3816229
12 Toddywalla VS, Joshi L, Virkar K. Effect of contraceptive steroids on human lactation. Am J Obstet Gynecol 1977;127:245–9.835620
13 Jordan HL, Bruinsma FJ, Thomson RJ, et al. Adolescent exposure to high-dose estrogen and subsequent effects on lactation. Reprod Toxicol 2007;24:397–402.17531440
14 Segev L, Weitzman G, Hijazi B, et al. Combined hormonal contraception with low-dose ethinylestradiol is associated with modest reduction of breast milk volume when administered vaginally, but not orally. Breastfeed Med 2026;21:351–8.42136078

## Substance Identification

### Substance Name

Ethinyl Estradiol

### CAS Registry Number

57-63-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Estrogens

Estrogenic Steroids, Alkylated